# Labetalol

CASRN: 36894-69-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of labetalol in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in fullterm breastfed infants. No special precautions are required in most infants. However, other agents may be preferred while nursing a preterm infant. Labetalol may predispose nursing mothers to Raynaud’s phenomenon of the nipple.

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding are more extensively excreted into breastmilk.[1] Accumulation of the drugs in the infant is related to the fraction excreted in urine. With 50% protein binding, 5% renal excretion and a moderate half-life, labetalol presents moderately low risk for accumulation in infants.

Maternal Levels. Random milk levels from 15 women on the third day postpartum averaged 27.5 mcg/L after maternal doses ranging from 330 to 400 mg daily. One of the women who took labetalol 400 mg daily for 5 weeks had no detectable drug in breastmilk (assay limit not specified). In another 9 women taking 600 to 800 mg daily, the average random milk level was 41 mcg/L. In one patient taking 1200 mg daily, a random milk level of 600 mcg/L was found.[2]

Peak milk levels averaging 70 mcg/L were found after a single 200 mg oral dose in 9 women.[3] Peak milk levels of 129, 223 and 662 mcg/L were found in 3 women taking 600, 600 and 1200 mg daily, respectively.[4] Peak milk levels occur 1 to 3 hours after the dose.[3,4]

Infant Levels. The average dose received by breastfed infants is estimated to be between 0.004% and 0.07% of the maternal dose.[3,5]

In a 6-day-old breastfed infant whose mother was taking labetalol 600 mg daily, labetalol in plasma was 18 and 21 mcg/L at 4 and 8 hours after the maternal dose; labetalol was undetectable in a 7-day-old infant whose mother was taking the same dosage.[4]

### Effects in Breastfed Infants

One investigator reported that no adverse effects occurred in breastfed infants whose mothers were taking labetalol in doses of 330 to 800 mg daily.[3]

A 26-week premature infant weighing 640 grams developed sinus bradycardia (80 to 90 bpm) and isolated atrial premature beats after nasogastric feeding with mother's pumped breastmilk began on day 8 of life. The mother was taking labetalol 300 mg twice daily by mouth for hypertension. Bradycardia and premature beats resolved within 24 hours of substitution of formula for breastmilk. No other causes for bradycardia could be identified. One untimed sample of the mother's breastmilk contained 710 mcg/L of labetalol.[6] Although the authors estimated the infant's dose to be 100 mg/kg daily, a recalculation using their data indicates that the infant's dose was only 100 mcg/kg daily.

A 2-month-old infant was being breastfed exclusively by a mother taking labetalol 100 mg twice daily. The infants electrocardiogram had a regular heart rate, but borderline prolonged QT. The infant was started on propranolol 1 mg/kg daily for infantile hemangioma. One month later, the infant had a normal QT interval. A second infant was exclusively breastfed by a mother taking labetalol 150 mg twice daily and nifedipine 60 mg daily. The infant was started on propranolol 0.6 mg/kg daily for infantile hemangioma. The propranolol dose was increased over 2 weeks to 3.4 mg/kg daily. The infant had some sleeping difficulties with the higher propranolol dose, but no other symptoms.[7]

A prospective study of pregnant patients taking a beta-blocker asked mothers to complete a questionnaire about postpartum breastfeeding and any side effects in their breastfed infants. One mother reported taking labetalol in an unreported dosage while breastfeeding. She reported weak sucking in her infant.[8]

### Effects on Lactation and Breastmilk

Intravenous labetalol can increase serum prolactin in men and non-nursing women, although the increase is greater in women. Oral labetalol does not increase serum prolactin.[9,10] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A woman with a history of symptoms of Raynaud's phenomenon developed Raynaud's phenomenon of the nipples when treated for pregnancy-induced hypertension with labetalol 100 mg twice daily. She breastfed for 5 weeks, but nursing caused pain in her nipples. In a subsequent pregnancy, similar symptoms occurred during treatment with labetalol 100 mg twice daily. Discontinuing labetalol eliminated the nipple pain in both instances.[11]

A pregnant woman was treated on two occasions with intravenous labetalol for pre-eclampsia. On each occasion, she reported a burning sensation of the nipples. While continuing on labetalol, sustained-release nifedipine was added to her regimen and the burning of the nipple did not return.[12]

### Alternate Drugs to Consider

Propranolol, Metoprolol

### References

1 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81.2878668
2 Michael CA. Use of labetalol in the treatment of severe hypertension during pregnancy. Br J Clin Pharmacol 1979;8 (Suppl 2):211S-5S. https://www.ncbi.nlm.nih.gov/pmc/articles/PMC1429751/
3 Leitz F, Bariletto S, Gural R, et al. Secretion of labetalol in breast milk of lactating women. Fed Proc 1983;42:378.
4 Lunell NO, Kulas J, Rane A. Transfer of labetalol into amniotic fluid and breast milk in lactating women. Eur J Clin Pharmacol 1985;28:597-9.4043203
5 Atkinson HC, Begg EJ, Darlow BA. Drugs in human milk: Clinical pharmacokinetic considerations. Clin Pharmacokinet 1988;14:217-40.3292101
6 Mirpuri J, Patel H, Rhee D, et al. What's mom on? A case of bradycardia in a premature infant on breast milk. J Investig Med 2008;56:409. doi:10.1097/01.JIM.0000308093.71382.c0
7 Aizman L, Van Den Anker J, Tender J, et al. Special management considerations for propranolol use in breastfed infants of mothers taking antihypertensives. Pediatr Dermatol 2020;37:537-40.32110833
8 Freppel R, Gaboriau L, Richardson M, et al. Beta-blockers and breastfeeding: A real-life prospective study. Eur J Clin Pharmacol 2024;80:1937-43.39259357
9 Barbieri C, Ferrari C, Caldara R, et al. Endocrine and metabolic effects of labetalol in man. J Cardiovasc Pharmacol 1981;3:986-91.6168866
10 Barbieri C, Larovere MT, Mariotti G, et al. Prolactin stimulation by intravenous labetalol is mediated inside the central nervous system. Clin Endocrinol (Oxf) 1982;16:615-9.7105431
11 McGuinness N, Cording V. Raynaud's phenomenon of the nipple associated with labetalol use. J Hum Lact 2013;29:17-9.23212937
12 Avila-Vega J, Urrea-Mendoza E, Lee C. Raynaud's phenomenon of the nipple as a side-effect of labetalol: Case report and literature review. Case Rep Womens Health 2019;23:e00135.31388502

## Substance Identification

### Substance Name

Labetalol

### CAS Registry Number

36894-69-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics